# Amphotericin B

CASRN: 1397-89-3

## Drug Levels and Effects

### Summary of Use during Lactation

Although no information exists on the milk excretion of amphotericin B, it is highly protein bound, has a large molecular weight, is virtually unabsorbed orally and has been use directly in the mouths of infants;[1] therefore, most reviewers consider it acceptable to use in nursing mothers.[2,3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Systemic) Fluconazole; (Topical) Clotrimazole, Miconazole, Nystatin

### References

1 Hoppe JE. (1997). Treatment of oropharyngeal candidiasis and candidal diaper dermatitis in neonates and infants: Review and reappraisal. Pediatr Infect Dis J.
2 Mactal-Haaf C, Hoffman M, Kuchta A. (2001). Use of anti-infective agents during lactation, Part 3: Antivirals, antifungals, and urinary antiseptics. J Hum Lact.
3 Ilett KF, Kristensen JH. (2005). Drug use and breastfeeding. Expert Opin Drug Saf.

## Substance Identification

### Substance Name

Amphotericin B

### CAS Registry Number

1397-89-3

### Drug Class

Breast Feeding

Lactation

Antifungal Agents